# Racecadotril

CASRN: 81110-73-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of racecadotril during breastfeeding. However, racecadotril has been given safely to infants as young as 3 months of age, so the amounts that are expected to be in milk are unlikely to harm a breastfed infant. Until more data become available, racecadotril should be used with caution while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Loperamide

## Substance Identification

### Substance Name

Racecadotril

### CAS Registry Number

81110-73-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidiarrheals